# Corticotropin

CASRN: 9002-60-2

## Drug Levels and Effects

### Summary of Use during Lactation

No information is available on the clinical use of corticotropin during breastfeeding. Because it is a relatively large molecule with a molecular weight of 4541 Da, it is unlikely to appear in breastmilk. Absorption by the infant is unlikely because it would probably be destroyed in the infant's gastrointestinal tract and poorly absorbed orally. It also has a half-life of only 10 to 15 minutes. Based on animal data, an increase in breastmilk cortisol levels might be expected after administration of corticotropin to a nursing mother.[1]

### Drug Levels

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### Alternate Drugs to Consider

Methylprednisolone, Prednisolone, Prednisone

### References

1 Pearlman W. Glucocorticoids in milk: A review. Endocrinol Exp 1983;17:165-74.6317337

## Substance Identification

### Substance Name

Corticotropin

### CAS Registry Number

9002-60-2

### Drug Class

Breast Feeding

Lactation

Milk, Human

Adrenocorticotropic Hormone

ACTH